# Aztreonam and Avibactam

CASRN: 1192500-31-4; 78110-38-0

SID: 392916388; 135011540

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that aztreonam produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Avibactam has not been studied in nursing mothers. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush, have been reported with beta-lactams, but these effects have not been adequately evaluated. Aztreonam-avibactam is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. After a single intramuscular dose of aztreonam 1 gram in 6 women, peak milk levels averaging 0.3 mg/L occurred 6 hours after the dose. In 6 other women given a single 1 gram dose of aztreonam intravenously, peak milk levels averaged 0.2 mg/L at 2.4 hours after the dose. Aztreonam was detectable (detection limit 0.09 mg/L) in milk between 2 and 8 hours after the intramuscular dose and 1.5 and 8 hours after the intravenous dose.[1,2]

After a single intravenous dose of aztreonam 1 gram, milk levels ranging from 0.4 to 1 mg/L occurred 1 to 5 hours after the dose in 10 women with little variation in milk levels during this time in each woman. On average, levels were slightly higher 2 hours after the dose, but in individuals the peak level occurred at various times between 1 and 4 hours.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Fleiss PM, Devlin R, Richwald G, et al. Aztreonam excretion in human milk. Clin Pharmacol Ther 1984;35:240. doi:10.1038/clpt.1984.32
2 Fleiss PM, Richwald GA, Gordon J, et al. Aztreonam in human serum and breast milk. Br J Clin Pharmacol 1985;19:509-11.4039600
3 Ito K, Hirose R, Tamaya T, et al. Pharmacokinetic and clinical studies of aztreonam in the perinatal period. Jpn J Antibiot 1990;43:719-26.2381040

## Substance Identification

### Substance Name

Aztreonam and Avibactam

### CAS Registry Number

1192500-31-4; 78110-38-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Monobactams